# Dulaglutide

CASRN: 923950-08-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of dulaglutide during breastfeeding. Because dulaglutide is a large protein molecule with a molecular weight of 59,669 daltons, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant’s gastrointestinal tract. Until more data become available, dulaglutide should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Some experts recommend closely monitoring of infant growth and developmental milestones and the nutritional status of the lactating woman.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Maslin K, Shawe J, Blowers S, . Incretin-based medications in women and reproduction: A systematic scoping review and consensus guidelines for clinical practice. Obes Rev 2026:e70203.42528099

### Alternate Drugs to Consider

(Diabetes) Acarbose, Colesevelam, Glipizide, Glyburide, Insulin, Metformin, Miglitol, Semaglutide, Tirzepatide

## Substance Identification

### Substance Name

Dulaglutide

### CAS Registry Number

923950-08-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Incretins

Glucagon-Like Peptide-1 Agonists

GLP-1 Agonists